# Crisaborole

CASRN: 906673-24-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of topical crisaborole during breastfeeding. Some experts recommend avoiding its use during lactation because of the lack of information.[1,2] In general, drugs applied to the mother’s skin are unlikely to affect the breastfed infant unless it is applied to the nipple or other area where the infant can directly ingest it. Use of crisaborole in nursing mothers is not contraindicated by the product labeling,

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Vestergaard C, Wollenberg A, Barbarot S, et al. European task force on atopic dermatitis position paper: treatment of parental atopic dermatitis during preconception, pregnancy and lactation period. J Eur Acad Dermatol Venereol 2019;33:1644-59.31231864
2 Yaghi M, McMullan P, Truong TM, et al. Safety of dermatologic medications in pregnancy and lactation: An Update - Part II: Lactation. J Am Acad Dermatol 2024;91:651-68.38280680

## Substance Identification

### Substance Name

Crisaborole

### CAS Registry Number

906673-24-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzyme Inhibitors

Phosphodiesterase Inhibitors